# Acenocoumarol

CASRN: 152-72-7

## Drug Levels and Effects

### Summary of Use during Lactation

Acenocoumarol is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in Canada and other countries. Because of the low levels of acenocoumarol in breastmilk, amounts ingested by the infant are small. No changes in coagulation measurements or adverse reactions in breastfed infants have been reported from maternal acenocoumarol use during lactation. There is a consensus that maternal acenocoumarol therapy during breastfeeding poses little risk to the breastfed infant.[1-3] No special precautions are necessary.

### Drug Levels

Maternal Levels. Twenty women were anticoagulated with oral acenocoumarol starting on the first day postpartum with 4 mg, followed by 2 mg daily for 2 days, then adjusted individually based on prothrombin time. After at least 5 days of therapy, milk samples were obtained before and at 1, 4, 7, and 10 hours after the dose. No breastmilk sample had acenocoumarol detected by HPLC assay (lower limit not stated).[1]

Sixteen patients who required anticoagulation immediately postpartum were given acenocoumarol in a dosage according to their clinical need. Two had their dosage titrated to an international normalized ratio (INR) between 1.5 and 1.9, nine were titrated to an INR between 2.0 and 2.5, and 4 were titrated to an INR between 2.6 and 3.5. Milk samples were analyzed for acenocoumarol on days 5, 15, 30 and 45 postpartum. On days 5 and 15 postpartum, acenocoumarol was detectable in only 4 patients at a concentration of 10 mcg/L. On days 30 and 45 postpartum, the average acenocoumarol concentrations in milk from all mothers were 11 and 12 mcg/L, respectively. On these latter days, the average dosage that an exclusively breastfed infant would receive would be about 1.6 and 1.8 mcg/kg daily, respectively, which is far below anticoagulant doses reported in the literature for infants.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Nineteen infants were breastfed (extent not stated) while their mothers were anticoagulated with acenocoumarol immediately postpartum. Despite not receiving prophylactic vitamin K at birth, none of the infants had abnormal blood clotting as measured by the Thrombotest after at least 5 days of maternal therapy.[1]

Seven infants were exclusively breastfed by mothers who were receiving long-term anticoagulation with acenocoumarol for thromboprophylaxis following heart valve replacement. All women were therapeutically anticoagulated and receiving an average of 21 mg of acenocoumarol per week (range 12 to 45 mg per week). Each infant received 1 mg of vitamin K prophylactically at birth and had their prothrombin time measured after at least 7 days of breastfeeding. The prothrombin times of the infants was not different from those of a control group of 42 breastfed infants whose mothers were not anticoagulated. No instances of bleeding were reported.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

### References

1 Houwert-de Jong M, Gerards LJ, Tetteroo-Tempelman CAM, et al. (1981). May mothers taking acenocoumarol breast feed their infants?. Eur J Clin Pharmacol.
2 Clark SL, Porter TF, West FG. (2000). Coumarin derivatives and breast-feeding. Obstet Gynecol.
3 Bates SM, Rajasekhar A, Middeldorp S, et al. (2018). American Society of Hematology 2018 guidelines for management of venous thromboembolism: Venous thromboembolism in the context of pregnancy. Blood Adv.
4 Nava LE, Gómez AB, González VM. (2004). Ginecol Obstet Mex.
5 Fondevila CG, Meschengieser S, Blanco A, et al. (1989). Effect of acenocoumarine on the breast-fed infant. Thromb Res.

## Substance Identification

### Substance Name

Acenocoumarol

### CAS Registry Number

152-72-7

### Drug Class

Breast Feeding

Lactation

Anticoagulants